# Gadoteridol

CASRN: 112188-16-6

## Drug Levels and Effects

### Summary of Use during Lactation

Although no data exist on the excretion of gadoteridol into milk, only 0.01 to 0.04% of the maternal gadolinium dose is present in breastmilk and there is limited gastrointestinal absorption in the breast-fed infant with other gadolinium contrast agents. Gadoteridol is one of the most stable gadolinium agents, theoretically making it one of the safer drugs to use during breastfeeding. Guidelines developed by several professional organizations state that breastfeeding need not be disrupted after a nursing mother receives a gadolinium-containing contrast medium.[1-4]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Gadobutrol, Gadoteridol, Gadoterate

### References

1 Copel J, El-Sayed Y, Heine RP, et al. Committee Opinion No. 723: Guidelines for diagnostic imaging during pregnancy and lactation. Obstet Gynecol 2017;130:e210-e6 28937575
2 European Society of Urogenital Radiology. ESUR guidelines on contrast media. 2018;Version 10.0.http://www.esur-cm.org/index.php/en/
3 American College of Radiology Committee on Drugs and Contrast Media. Administration of contrast media to breast-feeding mothers. In, ACR manual on contrast media. 2023;Version 2023:120-1. https://www.acr.org/Clinical-Resources/Contrast-Manual
4 Bookwalter CA, McDonald RJ, Packard AT, et al. Contrast media in pregnant and lactating patients, from the AJR special series on contrast media. AJR Am J Roentgenol 2024;224:e2431415 39046138

## Substance Identification

### Substance Name

Gadoteridol

### CAS Registry Number

112188-16-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contrast Media

Diagnostic Agents